# Ritlecitinib

CASRN: 1792180-81-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ritlecitinib during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during ritlecitinib therapy and for 14 hours after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ritlecitinib

### CAS Registry Number

1792180-81-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Breast Feeding

Enzyme Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors